# Cilostazol

CASRN: 73963-72-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of cilostazol during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. If it is used by a nursing mother, monitor the infant for bruising and bleeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspirin

## Substance Identification

### Substance Name

Cilostazol

### CAS Registry Number

73963-72-1

### Drug Class

- Breastfeeding
- Lactation
- Fibrinolytic Agents
- Platelet Aggregation Inhibitors